# Revumenib

CASRN: 2169919-21-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of revumenib during breastfeeding. Because it is 90% bound to plasma proteins, the amount in milk is likely to be very low. The manufacturer recommends that breastfeeding be discontinued during therapy and for 1 week after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Revumenib

### CAS Registry Number

2169919-21-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents